# Ambrisentan

CASRN: 177036-94-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of ambrisentan during breastfeeding. Because ambrisentan is more than 99% bound to plasma proteins, the amount in milk is likely to be low. The manufacturer recommends that breastfeeding be discontinued during ambrisentan therapy. Ambrisentan and its active metabolite should be completely eliminated from milk in 3 days.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Pulmonary Artery Hypertension) Bosentan, Epoprostenol, Nitric Oxide, Sildenafil, Treprostinil

## Substance Identification

### Substance Name

Ambrisentan

### CAS Registry Number

177036-94-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Cardiovascular Agents

Vasodilator Agents